# Bitolterol

CASRN: 30392-40-6

## Drug Levels and Effects

### Summary of Use during Lactation

Bitolterol is no longer marketed in the US. Although no published data exist on the use of bitolterol by mouth or inhaler during lactation, data from the closely related drug, terbutaline, indicate that very little is expected to be excreted into breastmilk.[1] The authors of several reviews and an expert panel agree that use of inhaled bronchodilators is acceptable during breastfeeding because of the low bioavailability and maternal serum levels after use.[2-4]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Terbutaline

### References

1 Lindberg C, Boréus LO, de Château P, et al. Transfer of terbutaline into breast milk. Eur J Respir Dis Suppl 1984;134:87-91.6586490
2 McDonald CF, Burdon JGW. Asthma in pregnancy and lactation. A position paper for the Thoracic Society of Australia and New Zealand. Med J Aust 1996;165:485-8.8937369
3 Nelson-Piercy C. Asthma in pregnancy. Thorax 2001;56:325-8.11254828
4 National Heart, Lung, and Blood, Institute, National Asthma, Education, and, Prevention, Program, Asthma, and, Pregnancy, Working, Group. NAEPP expert panel report. Managing asthma during pregnancy: recommendations for pharmacologic treatment-2004 update. J Allergy Clin Immunol 2005;115:34-46.15637545

## Substance Identification

### Substance Name

Bitolterol

### CAS Registry Number

30392-40-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Asthmatic Agents

Bronchodilator Agents

Beta Adrenergic Agonists